# Imiquimod

CASRN: 99011-02-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of imiquimod during breastfeeding. However, because the drug is used on a limited surface area and poorly absorbed into the maternal circulation, effects on the infant are unlikely. If imiquimod is required by the mother, it is not a reason to discontinue breastfeeding. Do not apply imiquimod to the breast or nipple and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Imiquimod

### CAS Registry Number

99011-02-6

### Drug Class

Breast Feeding

Lactation

Adjuvants, Immunologic

Antineoplastic Agents

Interferon Inducers